# Pegcetacoplan

CASRN: 2019171-69-6

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of pegcetacoplan during breastfeeding. Since only a small dose in injected intravitreally into the eye, it is unlikely that a clinically relevant amount would reach the infant in breastmilk. Pegcetacoplan was undetectable in the milk of one mother after systemic use; however, the manufacturer recommends that breastfeeding be discontinued during treatment and for 40 days after the last dose.

### Drug Levels

Maternal Levels. A woman with hemolytic paroxysmal nocturnal hemoglobinuria became pregnant. She was treated with pegcetacoplan 1080 mg subcutaneous three times a week near term. Two milk samples obtained on days 1 and 2 postpartum contained undetectable (<20 mg/L) amounts of pegcetacoplan. The time of the previous dose was not specified, but blood samples taken on the same days contained pegcetacoplan in therapeutic concentrations of 719 and 635 mg/L.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Paroxysmal Nocturnal Hemoglobinuria) Eculizumab

### References

1 Chin-Yee B, Hedley BD, Su R, et al. Paroxysmal nocturnal hemoglobinuria in pregnancy treated with pegcetacoplan: Case report and pharmacokinetic analysis. EJHaem 2025;6:e70179.41268092

## Substance Identification

### Substance Name

Pegcetacoplan

### CAS Registry Number

2019171-69-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complement Inactivating Agents